# Tamoxifen

CASRN: 10540-29-1

## Drug Levels and Effects

### Summary of Use during Lactation

Tamoxifen and its active metabolites are detectable in milk and accumulate in milk over time. It can also suppress lactation. If a mother requires treatment with tamoxifen, breastfeeding should be avoided.

### Drug Levels

Maternal Levels. A nursing mother was diagnosed with breast cancer and started on tamoxifen 20 mg daily at 8 am. Thirty-nine milk samples were collected over 23 days before and after tamoxifen initiation. For the first 15 days, two samples were collected each day, one in the afternoon and one in the evening. For the remaining 8 days, only one sample was collected each day. On day 1 of therapy, tamoxifen was detected in a concentration of 16.5 mcg/L at noon and 13.9 mcg/L at 11 pm. Milk concentrations increased steadily to a concentration of 79.5 mcg/L at an unrecorded time on day 23. Seven metabolites were also monitored and increased over the same time period. The two active metabolites, 4-hydroxytamoxifen and Z-endoxifen also increased over time and reached quantifiable levels at day 18. The authors noted that steady-state might not have been attained at the time of the last milk sample.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Tamoxifen was more effective than placebo in suppressing lactation and preventing engorgement and pain in two trials in postpartum mothers. Neither study stated what, if any, physical methods (e.g., breast binding) were used concurrently.[2,3] In one study of 80 women, tamoxifen 10 mg four times daily for 5 days during the first week postpartum was more effective than placebo in suppressing a rise in serum prolactin after use of a mechanical breast pump after 5 days of treatment, but not on day 3. All of the women in the study had breastfed a previous child.[2] The other study of 150 women used 2 regimens starting within 2 hours of delivery: tamoxifen 30 mg twice daily for 2 days, followed by 10 mg twice daily for 2 days; and 10 mg twice daily for 14 days. More women in the tamoxifen groups had not previously breastfed an infant.[3]

In a case report, a woman with a history of breastfeeding 4 children (the last having been weaned 10 months earlier) began lactating after 1 week of a cancer chemotherapy regimen for breast cancer that included tamoxifen 20 mg/day. Milk production continued for several weeks until tamoxifen was discontinued after which it did not return during 12 more weeks of chemotherapy.[4]

### References

1 Peccatori FA, Codacci-Pisanelli G, Mellgren G, et al. First-in-human pharmacokinetics of tamoxifen and its metabolites in the milk of a lactating mother: A case study. ESMO Open 2020;5:e000859 33115771
2 Masala A, Delitala G, Lo Dico, G, et al. Inhibition of lactation and inhibition of prolactin release after mechanical breast stimulation in puerperal women given tamoxifen or placebo. Br J Obstet Gynaecol 1978;85:134-7.626722
3 Shaaban MM. Suppression of lactation by an antiestrogen, tamoxifen. Eur J Obstet Gynecol Reprod Biol 1975;4:167-9 1053489
4 Favis GR, Alavi JB, Glick JH. Lactation from tamoxifen in breast cancer. Ann Intern Med 1979;90:993-4 443703

## Substance Identification

### Substance Name

Tamoxifen

### CAS Registry Number

10540-29-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Estrogen Antagonists